# Risankizumab

CASRN: 1612838-76-2

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of risankizumab during breastfeeding. Because risankizumab is a large protein molecule with a molecular weight of about 146,000 Da, the amount in milk is likely to be very low.[1] Absorption is unlikely because it is probably destroyed in the infant's gastrointestinal tract.[2] Some expert guidelines consider risankizumab to be acceptable during breastfeeding.[3] Waiting for at least 2 weeks postpartum to resume therapy may minimize transfer to the infant.[4]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Psoriasis) Adalimumab, Certolizumab Pegol, Etanercept, Infliximab, Phototherapy, Tretinoin

### References

1 Stratigakis A, Paty D, Zou P, et al. A regression approach for assessing large molecular drug concentration in breast milk. Reprod Breed 2023;3:199–207. doi:10.1016/j.repbre.2023.10.003
2 Anderson PO. Monoclonal antibodies during breastfeeding. Breastfeed Med 2021;16:591–3.33956488
3 Mahadevan U, Seow CH, Barnes EL, et al. Global consensus statement on the management of pregnancy in inflammatory bowel disease. Clin Gastroenterol Hepatol 2025;23 (11S):S1–S60.40874901
4 Krysko KM, Dobson R, Alroughani R, et al. Family planning considerations in people with multiple sclerosis. Lancet Neurol 2023;22:350–66.36931808

## Substance Identification

### Substance Name

Risankizumab

### CAS Registry Number

1612838-76-2

### Drug Class

Breastfeeding

Lactation

Milk, Human

Antibodies, Monoclonal

Anti-Inflammatory Agents

Dermatologic Agents